# Pimecrolimus

CASRN: 137071-32-0

## Drug Levels and Effects

### Summary of Use during Lactation

Topical pimecrolimus has not been studied during breastfeeding; however, it is used topically in children as young as 3 months of age. Because it is poorly absorbed after topical application and plasma concentrations after topical use in adults are less than 2 mcg/L, it is a low risk to the nursing infant. Ensure that the infant’s skin does not come into direct contact with the areas of skin that have been treated. Current guidelines allow topical pimecrolimus to be applied to the nipples just after nursing for eczema, with the nipples cleaned gently before nursing.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Tacrolimus

### References

1 Vestergaard C, Wollenberg A, Barbarot S, . European task force on atopic dermatitis position paper: treatment of parental atopic dermatitis during preconception, pregnancy and lactation period. J Eur Acad Dermatol Venereol 2019;33:1644–59.31231864
2 Deleuran M, Dézfoulian B, Elberling J, . Systemic anti-inflammatory treatment of atopic dermatitis during conception, pregnancy and breastfeeding: Interdisciplinary expert consensus in Northern Europe. J Eur Acad Dermatol Venereol 2024;38:31–41.37818828

## Substance Identification

### Substance Name

Pimecrolimus

### CAS Registry Number

137071-32-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents

Immunosuppressive Agents